# Melatonin

CASRN: 73-31-4

## Drug Levels and Effects

### Summary of Use during Lactation

Melatonin has no specific use during breastfeeding, and no data exist on the safety of maternal use of melatonin during breastfeeding. However, doses higher than those expected in breastmilk after maternal supplementation have been used safely in infants.[1] It is unlikely that short-term use of usual doses of melatonin in the evening by a nursing mother would adversely affect her breastfed infant, although some authors recommend against its use in breastfeeding because of the lack of data and a relatively long half-life in preterm neonates.[2,3]

Melatonin is the hormone produced by the pineal gland that plays a role in regulating sleep and circadian rhythm as well as a possible role in gut-brain signaling. It is also an antioxidant.[4-7] Melatonin is a normal component of breastmilk, with concentrations higher in colostrum than mature milk, during the nighttime (peak around midnight to 3 am) than daytime, and possibly higher milk levels following cesarean section.[7-15] Women who work the night shift have lower milk melatonin concentrations during the midnight to 6:30 am period than on days when they are not working, which increase on subsequent days of working the night shift.[16] Some authors suggest that mothers should nurse in the dark at night in order to avoid reductions in the melatonin content of breastmilk, which could disturb infant sleep patterns.[17] Some studies have attributed longer sleep time in breastfed infant than in formula-fed infants to melatonin in breastmilk.[18,19] Another study found higher colostrum melatonin levels at night which appeared to increase the phagocytic activity of colostral cells against bacteria.[20] Differentiating milk pumped during the day from milk pumped during darkness has also been suggested for women pumping milk for their infants.[6,8,21] A survey of 329 mothers found that infants who consumed mistimed expressed breastmilk took longer to get to sleep compared with infants who were directly breastfed, formula fed, fed timed expressed breast milk and fed breast milk/formula combined. Breastfed infants had more awakenings at night compared with infants who consumed mistimed expressed breastmilk.[22]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Melatonin is a normal component of human milk which is synthesized from the amino acid tryptophan.

Maternal Levels. A study of 169 mothers of newborns measured melatonin in milk samples. Milk samples were obtained at 8 am on days 3, 10, 25 and 55 for those with infants born at 24 to 33.9 weeks of gestation or of infants or on day 3 for those with infants born at 34 to 41 weeks of gestation. Median milk melatonin concentrations measured on day 3 were significantly higher in mothers who delivered before 34 weeks of gestation than in those who delivered after 34 of gestation (20 ng/L vs. 8 ng/L). In mothers who delivered between 24 to 33.9 weeks of gestation, median milk melatonin concentrations were stable, between 16 and 20 ng/L, from day 3 to 55.[12]

Ten nursing mothers who were 3 to 5 days postpartum had serum and breastmilk melatonin levels measured between 2 pm and 5 pm and again between 2 am and 4 am. The breastmilk melatonin level averaged 23 ng/L at night, an average of 35% of the maternal serum concentration. Melatonin was undetectable (<10 ng/L) in milk during the daytime. Six of the mothers collected milk after each feeding for 24 hours, once within 3 months of delivery. All mothers exhibited a marked circadian rhythm of melatonin excretion into breastmilk with detectable levels first occurring in the evening and dropping to undetectable levels in the morning.[23]

Twenty-one mothers collected breastmilk samples 5 times in a 24-hour period between day 5 and 10 postpartum. The median melatonin concentration in daytime milk (10 am to 10 pm) was 1.5 mg/L and the median concentration in nighttime milk (10 pm to 10 am) was 7.3 ng/L. No statistically significant difference was found between the breastmilk of mothers with preterm and full-term infants.[8]

Twenty-four healthy mothers and 24 mothers with allergic eczema were studied in a crossover fashion to watch either a humorous video, a non-humorous video, or no video at 2-week intervals. Melatonin was measured in breastmilk 5 times between 10 pm and 6 am. Melatonin levels were higher at all times in the mothers who had watched the humorous video. The melatonin levels in mothers with eczema were generally lower than in normal mothers, but had a greater increase to similar levels in both groups after viewing the humorous video. The highest milk melatonin levels occurred at the 2 am sampling in all phases of the study, with a peak of 20.8 ng/L in healthy mothers and 19.9 ng/L in those with eczema.[24]

In studies in which exogenous oral melatonin was given to women, the resulting serum melatonin was variable, but peak serum concentrations ranged from 1.1 to 2.6 mcg/L for each 1 mg administered.[25-27] This would result in an average increase in breastmilk melatonin concentration from 0.4 to 1 mcg/L for each 1 mg administered to the mother, based on an average milk concentration of 35% of the maternal serum concentration. While the resulting concentrations would be higher than the typical physiologic peak milk concentrations of 0.02 mcg/L,[23,24] it would present a considerably lower dose to the infant than the 10 mg/kg dosages of melatonin that have been safely administered to neonates in clinical studies.[1,17]

One study found that breastmilk melatonin concentration was inversely correlated with breastmilk prolactin concentration and was higher in women experiencing fatigue in the morning.[28]

Five nursing mothers provided breastmilk samples every 2 hours over a 24-hour period. Melatonin was undetectable during the day, but began to rise at about 8 pm, reaching a peak at about 3 am, and then declining.[18]

Thirty women who were 48 to 72 hours postpartum provided 2 colostrum samples, one at noon and one at midnight. Melatonin levels in colostrum averaged about 16 ng/L at noon and 36 ng/L at midnight.[20]

A study in Türkiye found that melatonin colostrum levels measured between 1:00 and 3:00 am between 48 and 72 hours postpartum were higher in mothers who delivered vaginally (mean 266 ng/L) than in those delivering by elective cesarean section (mean 205 ng/L) or emergency cesarean section (mean 167 ng/L). All differences between groups were statistically significant.[29]

Melatonin was analyzed in 392 breastmilk samples from 98 healthy nursing mothers at 0 to 30 days postpartum. Milk samples were obtained at 03:00, 09:00, 15:00, and 21:00 in one day. Peak milk levels occurred at 03:00 in both term and preterm milk. At 03:00 preterm colostrum had a higher average concentration than term colostrum 28.67 ng/L and 25.31 ng/L, respectively. Melatonin levels were numerically, but not statistically, higher in transitional and term milk at 03:00. The lowest levels of melatonin in milk occurred at 09:00 and 21:00.[10]

A study compared daytime and nighttime melatonin colostrum and milk levels in mothers who had an elective cesarean section (n=18) to mothers who had a vaginal delivery (n=21). Nighttime melatonin levels were higher in colostrum, transitional and mature milk in both groups, with nighttime melatonin ranging from 10.9 to 17.5 ng/L higher than daytime levels. Colostrum melatonin levels were higher in mothers who had an elective cesarean section (average 30.3 ng/L) than in mothers who had a vaginal delivery (average 14.7 ng/L).[15]

A study of milk samples from 62 breast milk samples (timing not stated) from patients in public maternity hospitals in the city of Goiânia, Brazil, were analyzed for melatonin and its metabolites, AFMK and AMK. Melatonin concentrations ranged from 12.44 to 78.03 ng/L (average 50 ng/L), AFMK ranged from 8.89 to 69.15 ng/L (average 20 ng/L), and AMK ranged from 2.05 to 37.94 ng/L (average 12 ng/L).[30]

A study of 20 breastfeeding primiparous mothers found melatonin levels in human milk

were relatively low during the daytime between 06:00 to 09:00 am and noon to 3:00 pm and then increased at 6:00 to 9:00 pm, peaking at midnight to 3:00 am. Higher level of tryptophan in human milk was also observed between 6:00 pm and 9:00 pm. Histidine, phenylalanine, tryptophan and tyrosine that may contribute to wakefulness had peak levels during daytime hours.[15]

Infant Levels. A study of 8 breastfed and 6 formula-fed infants found different patterns of the melatonin metabolite, 6-sulfatoxymelatonin, in their urine. Breastfed infants had a sinusoidal excretion pattern with a peak at 6 am and a trough at 6 pm. Formula-fed infants had a simple increase in the metabolite that was at baseline between about 8 pm and 4 am with a peak at about noon.[31]

Plasma melatonin levels were measured in 167 infants at birth and 173 infants on day 3 postpartum. Infants born before 34 weeks gestational age had significantly lower plasma melatonin concentrations both at birth and on day 3 postpartum compared to infants born after 34 weeks gestational age. More infants born at less than 34 weeks of gestation had deficient plasma levels of 7 ng/L or less compared to infants born at 34 weeks or greater at birth (78% vs 57%) or at 3 days of age (81% vs 34%). Median 24-hour urine concentrations of the melatonin metabolite, 6-sulfatoxy-melatonin were significantly lower in infants born before week 34 of gestation than in those born between after 34 weeks, both on day 1 (230 ng/L vs. 533 ng/L) and on Day 3 (197 ng/L vs. 359 ng/L).[12]

Serum melatonin was measured in preterm neonates in the NICU (n = 122) at day of life 4 to 7 and 10 to 14; and for infants <33 weeks’ gestational age, an additional sample at 35 to 36 weeks gestational age. The authors concluded that in breastmilk-fed preterm neonates, morning serum melatonin had substantial interindividual variability without consistent differences by time of birth, postmenstrual age, or weight-for-gestational-age.[32]

### Effects in Breastfed Infants

A study on 54 exclusively breastfed infants (n = 54), formula-fed infants (n = 40) and their mothers questioned their mothers regarding infant behavior. Melatonin was measured in the milk of 5 of the mothers. Exclusively breastfed infants had a lower incidence of colic attacks, lower severity of irritability attacks, and a trend for longer nocturnal sleep duration. Melatonin in human milk showed a circadian curve and was unmeasurable in all artificial milks.[18]

An 18-month-old breastfed infant was having bleeding episodes since birth. A platelet aggregation test showed that the infant had reduced platelet aggregation after breastfeeding. When the infant was fasting, platelet aggregation was normal. The infant's mother occasionally took melatonin up to 10 mg daily for sleep. After she stopped melatonin intake for 3 months, the infant's platelet aggregation was normal and the infant had no further bleeding episodes, even after major trauma.[33] The bleeding episodes were possibly caused by melatonin in milk.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gitto E, Aversa S, Reiter RJ, et al. Update on the use of melatonin in pediatrics. J Pineal Res 2011;50:21–8.21029156
2 Andersen LP, Gogenur I, Rosenberg J, et al. The safety of melatonin in humans. Clin Drug Investig 2016;36:169–75.26692007
3 Vine T, Brown GM, Frey BN. Melatonin use during pregnancy and lactation: A scoping review of human studies. Braz J Psychiatry 2022;44:342–8.34730672
4 Anderson G, Vaillancourt C, Maes M, et al. Breastfeeding and the gut-brain axis: Is there a role for melatonin? Biomol Concepts 2017;8:185–95.28723608
5 Häusler S, Lanzinger E, Sams E, et al. Melatonin in human breast milk and its potential role in circadian entrainment: A nod towards chrononutrition? Nutrients 2024;16:1422.38794660
6 Cavalcante-Silva V, de Oliveira AC, D'Almeida V, et al. Optimizing preterm infant nutrition: Valuing the potential of melatonin in breast milk. Br J Nutr 2025;133:1153–6.40375673
7 Aksu S, Arslan S. The circadian composition of breast milk: A natural starting point for chrononutrition. Curr Nutr Rep 2026;15:21.41790368
8 Katzer D, Pauli L, Mueller A, et al. Melatonin concentrations and antioxidative capacity of human breast milk according to gestational age and the time of day. J Hum Lact 2016;32:NP105–NP10.27121237
9 Molad M, Ashkenazi L, Gover A, et al. Melatonin stability in human milk. Breastfeed Med 2019;14:680–2.31381362
10 Qin Y, Shi W, Zhuang J, et al. Variations in melatonin levels in preterm and term human breast milk during the first month after delivery. Sci Rep 2019;9:17984.31784629
11 Italianer MF, Naninck EFG, Roelants JA, et al. Circadian cariation in human milk composition, a systematic review. Nutrients 2020;12:E2328.32759654
12 Biran V, Decobert F, Bednarek N, et al. Melatonin levels in preterm and term infants and their mothers. Int J Mol Sci 2019;20:2077.31035572
13 Oliveira FS, Dieckman K, Mota D, et al. Melatonin in human milk: A scoping review. Biol Res Nurs 2025;27:142–67.39041388
14 Cui M, Zhang J, Yu R, et al. The circadian variation of amino acids and melatonin in human milk and their potential sleep-wake regulation. Food Funct 2025;16:9476–88.41277618
15 Aparici-Gonzalo S, Carrasco-García Á, Gombert M, et al. Melatonin content of human milk: The effect of mode of delivery. Breastfeed Med 2020;15:589–94.32721174
16 Booker LA, Wilson D, Spong J, et al. Maternal circadian disruption from shift work and the impact on the concentration of melatonin in breast milk. Breastfeed Med 2024;19:33–9.38150529
17 Sánchez-Barceló EJ, Mediavilla MD, Reiter RJ. Clinical uses of melatonin in pediatrics. Int J Pediatr 2011;2011:892624.21760817
18 Cohen Engler A, Hadash A, Shehadeh N, et al. Breastfeeding may improve nocturnal sleep and reduce infantile colic: Potential role of breast milk melatonin. Eur J Pediatr 2012;171:729–32.22205210
19 Rudzik AE, Robinson L, Ball HL. Infant sleep duration and melatonin levels in exclusively breastfed and exclusively formula fed infants. Am J Hum Biol 2016;28:294. doi:10.1002/ajhb.22831
20 Honorio-Franca AC, Hara CCP, Ormonde JV, et al. Human colostrum melatonin exhibits a day-night variation and modulates the activity of colostral phagocytes. J Appl Biomed 2013;11:153–62. doi:10.2478/v10136-012-0039-2
21 Arslanoglu S, Bertino E, Nicocia M, et al. WAPM Working Group on Nutrition: Potential chronobiotic role of human milk in sleep regulation. J Perinat Med 2012;40:1–8.22848905
22 Booker LA, Spong J, Deacon-Crouch M, et al. Preliminary exploration into the impact of mistimed expressed breast milk feeding on infant sleep outcomes, compared to other feeding patterns. Breastfeed Med 2022;17:853–8.36137055
23 Illnerová H, Buresova M, Presl J. Melatonin rhythm in human milk. J Clin Endocrinol Metab 1993;77:838–41.8370707
24 Kimata H. Laughter elevates the levels of breast-milk melatonin. J Psychosom Res 2007;62:699–702.17540228
25 DeMuro RL, Nafziger AN, Blask DE, et al. The absolute bioavailability of oral melatonin. J Clin Pharmacol 2000;40:781–4.10883420
26 Fourtillan JB, Brisson AM, Gobin P, et al. Bioavailability of melatonin in humans after day-time administration of D(7) melatonin. Biopharm Drug Dispos 2000;21:15–22.11038434
27 Markantonis SL, Tsakalozou E, Paraskeva A, et al. Melatonin pharmacokinetics in premenopausal and postmenopausal healthy female volunteers. J Clin Pharmacol 2008;48:240–5.18071190
28 Groër M, Davis M, Casey K, et al. Neuroendocrine and immune relationships in postpartum fatigue. MCN Am J Matern Child Nurs 2005;30:133–8.15775810
29 Namlı Kalem M, Kalem Z, Yuce T, et al. Comparison of melatonin levels in the colostrum between vaginal delivery and cesarean delivery. Am J Perinatol 2018;35:481–5.29166676
30 Machado LS, de Oliveira NRL, de Macedo LLS, et al. Molecularly imprinted polymer integrated disposable pipette extraction method for rapid quantification of melatonin and metabolites in breast milk. Anal Chim Acta 2025;1370:344369.40750202
31 Cubero J, Valero V, Sanchez J, et al. The circadian rhythm of tryptophan in breast milk affects the rhythms of 6-sulfatoxymelatonin and sleep in newborn. Neuro Endocrinol Lett 2005;26:657–61.16380706
32 Kokkinaki T, Tzatzarakis M, Vakonaki E, et al. Blood melatonin in breast milk-fed preterm infants: longitudinal biomonitoring to 38 weeks' postmenstrual age (ProMote study). Children (Basel) 2025;12:1490.41300608
33 Iavarone S, Massoud M, Di Felice G, et al. Antiplatelet effect of melatonin through breastfeeding: A pediatric case report. Children (Basel) 2023;10:1839.38136041

## Substance Identification

### Substance Name

Melatonin

### CAS Registry Number

73-31-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Central Nervous System Depressants

Antioxidants